# Metolazone

CASRN: 17560-51-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of metolazone in breastmilk. Intense diuresis with large doses may decrease breastmilk production. Other diuretics in low doses are preferred over metolazone.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on metolazone was not found as of the revision date. Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[1-3] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;1:1353-4.doi:10.1016/S0140-6736(61)90289-6 4134342
2 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90 13973786
3 Stout G. Suppression of lactation. Br Med J 1962;1:1150 18117911

## Substance Identification

### Substance Name

Metolazone

### CAS Registry Number

17560-51-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics